# Isradipine

CASRN: 75695-93-1

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of isradipine during breastfeeding, an alternate drug may be preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Nifedipine, Nitrendipine

## Substance Identification

### Substance Name

Isradipine

### CAS Registry Number

75695-93-1

### Drug Class

- Breast Feeding
- Lactation
- Antihypertensive Agents
- Calcium Channel Blockers
- Vasodilator Agents